# Everolimus

CASRN: 159351-69-6

## Drug Levels and Effects

### Summary of Use during Lactation

The amounts of everolimus in milk is very small and would provide a dose less than dosages reportedly used safely in neonates of 0.1 to 0.5 mg daily. If a mother requires everolimus, it is not a reason to discontinue breastfeeding

### Drug Levels

Maternal Levels. A woman was receiving everolimus 2 mg daily and cyclosporine 1.5 mg/kg daily during pregnancy and postpartum following a heart transplant. Although she did not breastfeed, a colostrum sample was obtained one day postpartum which contained undetectable everolimus levels (<0.5 mcg/L). The timing of the sample with respect to the previous everolimus dose was not stated. Measurement of serial plasma levels of everolimus obtained transplacentally found the estimated elimination half-life of everolimus to be about 86 hours in the newborn.[1]

A woman with a kidney transplant received azathioprine 125 mg, methylprednisolone 12 mg, and everolimus 0.5 mg daily during pregnancy and postpartum. On the second day postpartum, 6 colostrum samples were collected. The pre-dose level was 33 ng/L. The highest level was 66 ng/L at 4 hours after the dose. Samples taken at 2, 6, 8 and 12 hours after the dose contained concentrations that ranged from 45 to 51 ng/L. The authors estimated the maximal dose of everolimus in colostrum (RID) was 0.38% of the mother’s dose.[2]

A woman with a liver transplant was taking prednisolone, cyclosporine, and everolimus 0.25 mg once daily during pregnancy and postpartum while breastfeeding. Breast milk samples were collected immediately before everolimus administration and at 3, 6, 9, and 12 hours after dosing on postpartum day 5. The highest milk concentration of 0.117 mcg/L was found at 9 hours after the dose. Based on the AUC0-24 analysis, the authors estimated the RID to be 0.30%.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A review of the Transplant Pregnancy Registry International database from 1999 to 2024 found that one mother with a transplant had breastfed her infant for at least 4 weeks while taking everolimus, although no infant outcome was reported.[4]

A woman with a liver transplant was taking prednisolone, cyclosporine, and everolimus 0.25 mg once daily during pregnancy and postpartum while breastfeeding. Initially, approximately 70% of the infant’s feeding consisted of breast milk. This proportion decreased to approximately 50% by 2 weeks postpartum. Breastfeeding was gradually tapered and continued until 10 months postpartum. The infant showed normal growth throughout infancy and no developmental abnormalities at 1 year of age.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Azathioprine, Cyclosporine, Tacrolimus

### References

1 Fiocchi R, D’Elia E, Vittori C, . First report of a successful pregnancy in an everolimus-treated heart-transplanted patient: Neonatal disappearance of immunosuppressive drugs. Am J Transplant 2016;16:1319-22.26555407
2 Kociszewska-Najman B, Szpotańska-Sikorska M, Mazanowska N, . Transfer of everolimus into colostrum of a kidney transplant mother. Ann Transplant 2017;22:755-8.29255138
3 Yoshimoto N, Ueda H, Kobayashi M, . Everolimus breast milk transfer after liver transplantation. Breastfeed Med 2026:15568253261483396.
4 Coscia LA, Kliniewski D, Rao S, . Breastfeeding after transplantation: 25 year review (1999-2024). Am J Transplant 2025;25:S772. doi:10.1016/j.ajt.2025.07.1820

## Substance Identification

### Substance Name

Everolimus

### CAS Registry Number

159351-69-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents